# Nitrofurantoin

CASRN: 67-20-9

## Drug Levels and Effects

### Summary of Use during Lactation

Administration of nitrofurantoin directly to infants under 1 month of age and in those with glucose-6-phosphate dehydrogenase (G6PD) deficiency is contraindicated because of potential hemolysis in these infants. However, the time of greatest risk for hemolysis in fullterm newborns without G6PD deficiency might be as short as 8 days after birth.[1] Nitrofurantoin doses in milk are low and it can be used while breastfeeding older infants, but alternate drugs are preferred in mothers of infants under 8 days of age, or infants with G6PD deficiency of any age. Observe infants for possible diarrhea.

### Drug Levels

The time of the peak amounts in milk depends on the food taken with the drug and the dosage form of the drug. Rapid-release capsules of nitrofurantoin macrocrystals reach their peak milk levels either 1 to 2 hours after the dose with food or 4 hours after a high-fat meal. The sustained-release product (Macrobid) has not been studied, but probably has a delayed peak milk time that would be difficult to predict in an individual mother.

Maternal Levels. In one early report, random samples of milk from several women in the first few days postpartum who were receiving 100 mg orally 4 times daily were tested for nitrofurantoin. Nitrofurantoin was undetectable (<2 mg/L) in 20 samples measured.[2]

A second study found milk levels ranging from 0 to 0.5 mg/L in 4 women (time postpartum not stated) 2 hours after a single dose of 200 mg of nitrofurantoin was given orally during therapy with 100 mg 4 times a day. In 5 others receiving 100 mg orally 4 times daily, no drug was detected in milk levels (assay limit not stated).[3]

Six women who were 3 to 6 days postpartum were given 50 or 100 mg of nitrofurantoin macrocrystals orally 3 times a day. Nitrofurantoin was undetectable (<10 mcg/L) in all women before the first dose of the second day of administration with breakfast (fat content not stated). Peak milk levels occurred 1 to 2 hours after the dose. Mothers taking the 50 mg dose had an average of 0.49 mg/L (range 0.2 to 0.7 mg/L) in milk 3 hours after the dose and those given 100 mg had milk levels of 1.19 mg/L (range 0.62 to 2.22 mg/L) in milk at 3 hours. The authors calculated that between 0.06 and 0.28% of a dose was excreted into milk during the 6 hours after a dose.[4]

Four women who were 8 to 26 weeks postpartum received a single 100 mg dose of nitrofurantoin macrocrystals orally with a high-fat meal. Under these conditions, peak milk levels occurred 4 to 6 hours after the dose. Peak levels averaged 2.7 mg/L (range 2.2 to 3.2 mg/L). Milk levels were higher than serum levels and much higher than predicted at all times, indicating active transport into milk. Nevertheless, an exclusively breastfed infant would receive only 0.2 mg/kg daily or about 6% of the weight-adjusted maternal dosage.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a prospective follow-up study, 6 nursing mothers reported taking nitrofurantoin (dosage and dosage form not specified). Two mothers reported diarrhea in their infants. No rashes or candidiasis were reported among the exposed infants.[6]

### Effects on Lactation and Breastmilk

In a prospective follow-up study, 1 of 6 nursing mothers who took nitrofurantoin (dosage unspecified) reported a decrease in milk supply.[6] It is not known if there was a causal relationship.

### Alternate Drugs to Consider

Ciprofloxacin, Levofloxacin, Trimethoprim

### References

1 Zao J, Koren G, Bozzo P. Using nitrofurantoin while breastfeeding a newborn. Can Fam Physician 2014;60:539-40 24925943
2 Hosbach RE, Foster RB. Absence of nitrofurantoin from human milk. JAMA 1967;202:1057 6072610
3 Varsano I, Fischl J, Shochet SB. The excretion of orally ingested nitrofurantoin in human milk. J Pediatr 1973;82:886-7 4735457
4 Pons G, Rey E, Richard MO, et al. Nitrofurantoin excretion in human milk. Dev Pharmacol Ther 1990;14:148-52 2364853
5 Gerk PM, Kuhn RJ, Desai NS, et al. Active transport of nitrofurantoin into human milk. Pharmacotherapy 2001;21:669-75 11401180
6 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9 8498418

## Substance Identification

### Substance Name

Nitrofurantoin

### CAS Registry Number

67-20-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents, Urinary

Antibacterial Agents

Nitrofurans